# Cariprazine

CASRN: 839712-12-8

## Drug Levels and Effects

### Summary of Use during Lactation

Although amounts of cariprazine and its active metabolites in milk are relatively low, the metabolite half-lives are long. Two mothers taking cariprazine 4.5 mg daily reported lethargy and other side effects in their infant, possibly from metabolite accumulation in the infants’ bloodstreams. Cariprazine might decrease lactation. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Cariprazine is metabolized to two major active metabolites with a half-life of 2 to 4 days. Desmethylcariprazine has a half-life of 1 to 2 days, and didesmethylcariprazine has a half-life of 1 to 3 weeks. Both are considered to be equipotent to cariprazine. The drug and metabolites are all >90% bound to plasma proteins.

Maternal Levels. Five nursing mothers who were taking cariprazine 1.5 to 4.5 mg daily collected timed milk samples at 0, 1, 2, 4, 6, 8, 10, 12, 18, and 24 hours after a dose at home. The relative infant dosages of cariprazine, desmethylcariprazine, and didesmethylcariprazine were 1.4%, 0.11%, and 1.45%, respectively for a total RID of 2.97%. When the authors normalized the RID for a dose of 3 mg daily, the total RID was 2.54%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two mothers in a study who were taking cariprazine 4.5 mg daily during pregnancy and postpartum reported adverse effects in their breastfed infant. The first, who took cariprazine, buspirone and trazodone for bipolar disorder reported infant withdrawal, lethargy and low platelets, but no concern for developmental delay in her infant from 1 to 3 months postpartum. The second, who took cariprazine, levothyroxine, multivitamins, insulin lispro, and amitriptyline, reported lethargy, struggling to eat and weight faltering in her infant from 11 days to 4 weeks of age. After 2 weeks on a lowered cariprazine dose of 1.5 mg daily, the infant’s symptoms improved.[1]

### Effects on Lactation and Breastmilk

Cariprazine has little to no effect on serum prolactin levels.[2] It is possible that cariprazine might decrease lactation like aripiprazole and benznidazole because they are pharmacologically similar, but no cases have been reported.[3]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Balamurali S, Trehan S, Stark A, . Cariprazine in human milk: Cautionary implications for use during lactation. J Clin Psychopharmacol 2026;46:549-55.42085651
2 Culpepper L, Vieta E, Kelly DL, . Minimal effects of cariprazine on prolactin levels in bipolar disorder and schizophrenia. Neuropsychiatr Dis Treat 2022;18:995-1011.35591886
3 Naughton S, O’Hara K, Nelson J, . Aripiprazole, brexpiprazole, and cariprazine can affect milk supply: Advice to breastfeeding mothers. Australas Psychiatry 2023;31:201-4.36825499

## Substance Identification

### Substance Name

Cariprazine

### CAS Registry Number

839712-12-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents